# Immune Globulin

CASRN: 9007-83-4

## Drug Levels and Effects

### Summary of Use during Lactation

Immune globulin G (IgG) is a normal component of breastmilk. Data from 2 mothers indicate that IgG concentrations in milk are normal or higher and IgM levels in milk are normal or lower during intravenous immunoglobulin (IVIG) therapy. The antibacterial activity of milk in these women was normal. There appears to be an emerging consensus that intravenous immune globulin is the treatment of choice for postpartum mothers with multiple sclerosis who are breastfeeding,[1-4] although one retrospective study failed to find a decrease in relapse rate among mothers who received IgG postpartum.[5] Rare cases of transient rash have been reported in breastfed infants during maternal IVIG therapy. No special precautions are required during breastfeeding.

### Drug Levels

Maternal Levels. Colostrum (3 days postpartum) and milk (7 days postpartum) samples from 2 mothers who were receiving IVIG for the treatment of common variable immunodeficiency were studied. One mother was receiving 400 to 500 mg/kg of IVIG monthly and the other received 600 to 700 mg/kg of IVIG monthly. The time of the last dose before sample collection was not reported. IgG concentrations were normal in the first mother's colostrum and milk and higher than normal in the colostrum of the second mother. IgM levels were normal in the colostrum and milk first mother and low in the second. The colostrum and milk of both mothers strongly inhibited adhesion of enteropathogenic Escherichia coli in vitro.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a retrospective study of 108 women with relapsing-remitting multiple sclerosis, 69 received IVIG postpartum. Those who received IVIG received either 0.4 g/kg daily for 5 days plus additional doses of 0.4 g/kg at 6 and 12 weeks postpartum (n = 41), or IVIG 0.4 g/kg daily for 5 days during the first 6 to 8 weeks of pregnancy, then 0.4 g/kg every 6 weeks until 12 weeks postpartum. Seventy-three percent of the 108 infants were breastfed until 3 to 12 weeks postpartum. No serious adverse event occurred in any of the infants and the mothers who breastfed had outcomes as good as those who did not.[7]

A case series reported 43 women with multiple sclerosis who received 60 grams of IVIG within 3 days of delivery and 10 grams monthly. All of the women breastfed their infants for at least 4 weeks. The only adverse effect reported in infants was a transient rash one day after a maternal dose of IVIG which was possibly caused by the IVIG. The relapse rate was lower than with historical controls who did not receive IVIG.[8]

A European double-blind, randomized trial compared two IVIG regimens in 168 postpartum mothers with multiple sclerosis to observe the relapse rate. One group received 150 mg/kg within 24 hours of delivery and monthly for 6 months. The other group received 450 mg/kg within 24 hours of delivery, 300 mg/kg on day 2 and 150 mg/kg on day 3 postpartum followed by monthly doses of 150 mg/kg until 6 months postpartum. More mothers who breastfed for 3 months or longer were relapse free during the study than those who did not breastfed or who breastfed less than 3 months. In all, 91 mothers breastfed for 3 months or longer and 48 mothers breastfed for less than 3 months. No mention was made of adverse effects in breastfed infants.[9]

A woman with pemphigoid gestationis was treated with several courses of intravenous immune globulin 2 grams/kg over 3 days during pregnancy as well as at 4, 9 and 13 weeks postpartum. She was also receiving prednisolone in a dosage tapering from 0.7 mg/kg daily to 1 mg daily. She breastfed her infant (extent not stated) for 3 months with no problems noted.[10]

In a study comparing the timing of IVIG on the relapse of relapsing-remitting multiple sclerosis, 24 patients were treated with IVIG starting in the first 24 hours after delivery and during lactation. The authors concluded that IVIG is effective in reducing the frequency of postpartum-related relapses. No adverse effects were noted. Further details were not provided in the published abstract.[11]

A mother with pemphigus vulgaris received three cycles of IVIG 120 grams intravenously for 5 days during pregnancy along with daily prednisolone 30 mg orally. She gave birth to a normal, healthy infant with no skin lesions and breastfed her infant (extent not stated). About 21 days after delivery, she began her fourth cycle of IVIG. On the second day of IVIG therapy, the neonate developed an erythematous, purpuric macular rash all over the body with no clinical or laboratory indication of systemic infection. The rash resolved within a few days without any intervention.[12] The rash was possibly caused by IVIG.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Interferon Beta, Methylprednisolone

### References

1 Dudesek A, Zettl UK. Intravenous immunoglobulins as therapeutic option in the treatment of multiple sclerosis. J Neurol 2006;253 (Suppl 5):V50–8.16998754
2 Ferrero S, Pretta S, Ragni N. Multiple sclerosis: Management issues during pregnancy. Eur J Obstet Gynecol Reprod Biol 2004;115:3–9.15223156
3 Ringel I, Zettl UK. Intravenous immunoglobulin therapy in neurological diseases during pregnancy. J Neurol 2006;253 (Suppl 5):V70–4.16998758
4 Kaplan TB. Management of demyelinating disorders in pregnancy. Neurol Clin 2019;37:17–30.30470273
5 Fragoso YD, Adoni T, Alves-Leon SV, et al. Postpartum treatment with immunoglobulin does not prevent relapses of multiple sclerosis in the mother. Health Care Women Int 2015;36:1072–80.25187102
6 Palmeira P, Costa-Carvalho BT, Arslanian C, et al. Transfer of antibodies across the placenta and in breast milk from mothers on intravenous immunoglobulin. Pediatr Allergy Immunol 2009;20:528–35.19220771
7 Achiron A, Kishner I, Dolev M, et al. Effect of intravenous immunoglobulin treatment on pregnancy and postpartum-related relapses in multiple sclerosis. J Neurol 2004;251:1133–7.15372259
8 Haas J. High dose IVIG in the post partum period for prevention of exacerbations in MS. Mult Scler 2000;6 (Suppl 2):S18–20.11188773
9 Haas J, Hommes OR. A dose comparison study of IVIG in postpartum relapsing-remitting multiple sclerosis. Mult Scler 2007;13:900–8.17881400
10 Gan DC, Welsh B, Webster M. Successful treatment of a severe persistent case of pemphigoid gestationis with antepartum and postpartum intravenous immunoglobulin followed by azathioprine. Australas J Dermatol 2012;53:66–9.22309336
11 Winkelmann A, Benecke R, Zettl U. Effect of intravenous immunoglobulin treatment on pregnancy and postpartum-related relapses in multiple sclerosis: A prospective, rater-blinded analysis. Neurology 2012;78 (1 Suppl):P06.
12 Bostan E, Gülseren D, Ersoy Evans S, et al. Efficacious treatment of pemphigus vulgaris by intravenous immunoglobulin during pregnancy and postpartum period. Dermatol Ther 2020;33:e13187.31830346

## Substance Identification

### Substance Name

Immune Globulin

### CAS Registry Number

9007-83-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Immunoglobulin G

Immunoglobulins